# Simethicone

CASRN: 8050-81-5

## Drug Levels and Effects

### Summary of Use during Lactation

Although no data are available on the use of simethicone during breastfeeding, it is not absorbed orally. Therefore, it cannot be transferred to breastmilk.[1] It is also used safely given directly to infants.[2,3] No special precautions are required.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Mahadevan U, Kane S. American Gastroenterological Association Institute Technical Review on the Use of Gastrointestinal Medications in Pregnancy. Gastroenterology 2006;131:283-311 16831611
2 Hagemann TM. Gastrointestinal medications and breastfeeding. J Hum Lact 1998;14:259-62 10205441
3 Savino F, Pelle E, Palumeri E, et al. Lactobacillus reuteri (American Type Culture Collection Strain 55730) versus simethicone in the treatment of infantile colic: A prospective randomized study. Pediatrics 2007;119:e124-30 17200238

## Substance Identification

### Substance Name

Simethicone

### CAS Registry Number

8050-81-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Gastrointestinal Drugs

Antifoaming Agents